# Ginger

## Drug Levels and Effects

### Summary of Use during Lactation

Ginger (Zingiber officinale) root contains the pungent principles or gingerols such as 6-gingerol and 6-shogaol, that are considered to be responsible for its pharmacological activity. Ginger is commonly used for nausea and motion sickness. It is reportedly used as a galactogogue in Türkiye, Indonesia and some parts of Asia, but also thought to decrease milk supply in some cultures.[1-5] Ginger is also reportedly used as part of a topical herbal mixture to shorten the time to full lactation and or alone or as part of a topical herbal mixture used for breast engorgement.[6-8] A systemic review of 5 studies on ginger as a galactogogue alone or in combinations with other herbals found weak evidence that ginger may increase milk supply in mothers who had a natural delivery, but not in mothers who had a cesarean section.[9] Other subsequent studies found steamed ginger extract increased milk flow rate more than placebo at 36 and 48 hours postpartum.[10,11] Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[12,13] Very limited data exist on the safety and efficacy of ginger in nursing mothers or infants. However, ginger has a long history of use as a food and medicine and is "generally recognized as safe" (GRAS) as a food flavoring by the U.S. Food and Drug Administration, including during lactation.[14] When used as a medicinal, ginger is generally well tolerated in adults, but mild side effects such as bad taste, heartburn, abdominal discomfort, weight gain, headache, dry mouth and nausea are reported occasionally. Ginger can increase bleeding risk when taken with warfarin.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman was treated with a number of Ayruvedic treatments for rheumatoid arthritis postpartum. One of the products used was ginger 250 mg orally twice daily for 3 months. She reportedly breastfed her infant (extent not stated) throughout treatment and the infant had normal growth and development.[15]

In a study of exclusively nursing mothers receiving fenugreek seed 200 mg, turmeric 100 mg and ginger 120 mg (Fenucaps; Herbal Acharn's Home Co. Ltd., Thailand) 3 times daily for 4 weeks, no adverse events were reported in their infants, although the method used to determine this finding were not reported.[16]

### Effects on Lactation and Breastmilk

A study in Japan compared the use of a mixture of 13 herbs, including ginger, to ergonovine for their effects on lactation and serum prolactin in postpartum women. The herbal mixture, called Xiong-gui-tiao-xue-yin, was given in a randomized fashion to 41 women in a dose of 2 grams of a dried aqueous extract 3 times daily. A comparable group of 41 women were randomized to receive methylergonovine 0.375 mg daily. Therapy started on the day of delivery, but the duration of therapy was not specified. Plasma oxytocin and prolactin were measured on days 1 and 6; milk volumes were measured daily, although the method of measuring milk volume was not specified. Serum prolactin was higher on days 1 and 6 in the women who received the herbals; plasma oxytocin was lower on day 1 in the women who received the herbal, but not different on day 6. Milk volumes were greater on days 4, 5, and 6 in women who received the herbal mixture.[17] This study has serious flaws that make its interpretation impossible. First, milk volume measurement is subject to considerable variability depending on the measurement method used, but the method was not specified. Second, methylergonovine has caused decreases in serum prolactin and milk production in some studies.[18,19] Because of the lack of a placebo group, the differences found could be a negative effect of methylergonovine rather than a positive effect of the herbal preparation. Because this study used a multi-ingredient combination product in which ginger was only one component, the results might be different from studies in which ginger was used alone.

Studies of Thai herbal compresses containing ginger, turmeric and camphor have evaluated the effect of application of the compresses to the breasts on lactation. The studies showed that the compresses shortened the time to lactation postpartum compared to routine clinical care for enhancing lactation.[6]

A randomized, double-blind study in Thailand compared the milk output of mothers taking either dried ginger 500 mg or placebo twice daily starting within 2 hours after delivery. On day 3, mothers receiving ginger produced a statistically significantly greater volume of milk than those receiving placebo, 191 mL per 24 hours compared to 135 mL per 24 hours. On day 7 postpartum, the ginger group produced an average of 80 mL/hour of milk compared to 112 mL/hour in the placebo group, although the difference was not statistically significant. No significant difference in serum prolactin was found between the two groups on day 3 postpartum.[20]

A randomized trial in women with breast engorgement compared warm compresses to warm compresses containing a mixture of dried herbs, including ginger, lemon grass, Stapf leaves and leaf sheaths, Acacia concinna leaves, tamarind leaves, Citrus hystrix (kaffir lime) peels, Blumea balsamifera (sambong) leaves, salt and camphor. Both treatments relived the pain of engorgement, but women who received the compress with herbs (n = 250) had greater pain relief than those who received the warm compress alone. Because of the possible color and odor differences between treatments, the study cannot be considered to be blinded.[7]

Fifty women in Thailand who were 1 month postpartum and exclusively breastfeeding were randomized to receive either a placebo or capsules containing fenugreek seed 200 mg, turmeric 100 mg and ginger 120 mg (Fenucaps; Herbal Acharn's Home Co. Ltd., Thailand) 3 times daily for 4 weeks. Participants pumped milk on 2 days at 0, 2 and 4 weeks of the study. The average milk volumes increased by 49% at 2 weeks and 103% at 4 weeks among participants receiving the active product. The macronutrient composition of the milk did not change in either group over the 4-week period. Growth of infants was not reported.[16]

A randomized, double-bind study of 70 women who delivered by cesarean section in a hospital in Thailand compared 35 who took 5 grams of instant ginger powder in water to 35 who took a placebo with ginger scent, but no ginger. The products were taken every 12 hours up to 72 hours postpartum, starting at 24 hours postpartum. Breastmilk volumes were measured by test weighing their infants. Total milk volume between 48 and 72 hours postpartum were compared. The median total breast milk volumes during this time were 80 mL in the ginger group and 100 mL in the placebo group. The difference was not statistically significant.[21]

A randomized study compared nursing mothers with breast engorgement who received either a hot compress (n = 38) or hot ginger compress (n = 38) three times daily for 2 days. The women who received the ginger compresses had a greater decrease in breast pain than those who received the hot compresses.[8]

In a survey of nursing mothers in Australia, 52 mothers were taking ginger as a galactogogue. On average, mothers rated ginger as “slightly effective” on a Likert scale. Six percent of mothers taking ginger reported experiencing adverse reactions, such as weight gain, headache, dry mouth and nausea.[22]

A randomized study of women who delivered a single infant vaginally compared domperidone 10 mg to the Thai herbal product, Plook-Fire-Thatu and placebo, each given three times daily starting on the first day postpartum. Plook-Fire-Thatu contains several herbs from the genus Piper (pepper) and piperine may be the active ingredient. Piperine also enhances the bioavailability of some chemicals. Ginger, which is a purported galactogogue, is also included in the formula. Milk output was measured by test weighing infants three times daily. On day 3 of treatment, the herbal product resulted in a greater increase in milk production than placebo or domperidone, but there was no difference in infant weights between groups. Maternal temperatures were greater in the herbal group, which is in accord with the Chinese theory of increasing heat to improve lactation.[23]

A randomized study compared capsules containing steamed ginger extract 200 mg (n = 33) to placebo (n = 33) three times daily for two days starting at two to six hours after her delivery in primiparous mothers who delivered an infant of at least 37 weeks gestational age. The ginger extract contained 6-gingerol at 77.4 mg/gram and 6-shogaol at 26.2 mg/gram. Milk flow was rated on a 4-point scale according to predetermined criteria by an investigator. At 36 and 48 hours postpartum, milk flow was greater in ginger than placebo patients.[10]

A non-blinded, randomized study in Ghana compared the milk volume and serum prolactin among postpartum women who drank a ginger-spiced beverage containing 74% millet, 25% soy, 1% ginger to women who were given breastfeeding education alone and those who received no education (25 women in each group). Milk volume was determined from a single pumped sample and serum prolactin was collected between 9 am and 10 am. Measurements were made on days 1, 7 and 14. In the control group, there was little difference in milk volume and serum prolactin between day 1 and days 7 or 14. Both the education group and ginger-containing drink had higher milk volumes and serum prolactin levels on days 7 and 14, with those receiving the drink having the highest volumes and prolactin levels.[24] It is not possible to determine the contribution of ginger to increased milk production in this study.

A randomized, controlled study compared capsules containing 200 mg of steamed ginger powder to placebo, given 3 times daily for 3 days. Postpartum primiparous women started taking the capsules within 2 hours postpartum. The amount of milk that was expressed from each breast by compressing the nipple at 24 and 48 hours postpartum was compared between groups. Little difference was found between the groups at 24 hours postpartum, but at 48 hours postpartum, the women in the ginger group had about double the amount of milk expression. However, the amounts of milk expressed (1.8 mL vs 3.6 mL) were small and no further follow-up was reported.[11]

### References

1 Lamxay V, de Boer HJ, Bjork L. Traditions and plant use during pregnancy, childbirth and postpartum recovery by the Kry ethnic group in Lao PDR. J Ethnobiol Ethnomed 2011;7:14.21569234
2 Kaygusuz M, Gümüştakım RŞ, Kuş C, et al. TCM use in pregnant women and nursing mothers: A study from Turkey. Complement Ther Clin Pract 2021;42:101300.33412511
3 Sayuti NA, Atikah N. The pattern of herbal medicines use for breastfeeding mother in Jogonalan, Klaten, Indonesia: A mini survey. BMC Complement Med Ther 2023;23:399.37936188
4 Panjaitan RGP, Aprilianti M, Titin, et al. Genetic potential of medicinal plants and their role in improving colostrum production in Dayak Kanayatn tribe, Bengkayang Regency, Indonesia. Sabrao Journal of Breeding and Genetics 2025;57:115–25. doi:10.54910/sabrao2025.57.1.12
5 Eid AM, Jaradat N. Public knowledge, attitude, and practice on herbal remedies used during pregnancy and lactation in West Bank Palestine. Front Pharmacol 2020;11:46.32116721
6 Dhippayom T, Kongkaew C, Chaiyakunapruk N, et al. Clinical effects of Thai herbal compress: A systematic review and meta-analysis. Evid Based Complement Alternat Med 2015;2015:942378.25861373
7 Ketsuwan S, Baiya N, Paritakul P, et al. Effect of herbal compresses for maternal breast engorgement at postpartum: A randomized controlled trial. Breastfeed Med 2018;13:361–5.29688768
8 Monazzami M, Yousefzadeh S, Rakhshandeh H, et al. Comparing the effects of hot compress and hot ginger compress on pain associated with breast engorgement. Nursing and Midwifery Studies 2021;10:73–8. doi:10.4103/nms.nms_24_20
9 Dilokthornsakul W, Rinta A, Dhippayom T, et al. Efficacy and safety of ginger regarding human milk volume and related clinical outcomes: A systematic review of randomized controlled trials. Complement Med Res 2022;29:67–73.33789272
10 Jirasinlapasat N, Jaiarree N, Itharat A, et al. The efficacy of steamed ginger extract, hot herbal compress on breast milk flow rate in normal first-time postpartum women in the early postpartum period. J Med Assoc Thai 2025;108:330–8. doi:10.35755/jmedassocthai.2025.4.330-338-02144
11 Poomirat S, Jaiarree N, Roekruangrit N, et al. Efficacy of steamed ginger extract capsule on breast milk flow rate among primiparous women following normal vaginal delivery: A randomized, double-blind, placebo-controlled trial. J Med Assoc Thai 2026;109:468–75. doi:10.35755/jmedassocthai.2026.5.03913
12 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307–14.29902083
13 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42–e53.33481531
14 O'Hara M, Kiefer D, Farrell K, et al. A review of 12 commonly used medicinal herbs. Arch Fam Med 1998;7:523–36.9821826
15 Deshpande SV, Deshpande VS, Potdar SS. Effect of panchakarma and Ayurvedic treatment in postpartum rheumatoid arthritis (amavata): A case study. J Ayurveda Integr Med 2017;8:42–4.28302414
16 Bumrungpert A, Somboonpanyakul P, Pavadhgul P, et al. Effects of fenugreek, ginger, and turmeric supplementation on human milk volume and nutrient content in breastfeeding mothers: A randomized double-blind controlled trial. Breastfeed Med 2018;13:645–50.30411974
17 Ushiroyama T, Sakuma K, Souen H, et al. Xiong-gui-tiao-xue-yin (Kyuki-chouketsu-in), a traditional herbal medicine, stimulates lactation with increase in secretion of prolactin but not oxytocin in the postpartum period. Am J Chin Med 2007;35:195–202.17436360
18 Peters F, Lummerich M, Breckwoldt M. Inhibition of prolactin and lactation by methylergometrine hydrogenmaleate. Acta Endocrinol (Copenh) 1979;91:213–6.463447
19 Arabin B, Ruttgers H, Kubli F. Effects of routine administration of methylergometrine during puerperium on involution, maternal morbidity and lactation. Geburtshilfe Frauenheilkd 1986;46:215–20.3519353
20 Paritakul P, Ruangrongmorakot K, Laosooksathit W, et al. The effect of ginger on breast milk volume in the early postpartum period: A randomized, double-blind controlled trial. Breastfeed Med 2016;11:361–5.27505611
21 Sassanarakkit S, Kaiwong S, Chittacharoen A. A study on instant ginger drink effect in enhancing postpartum breastfeeding in immediate post cesarean delivery. J Med Assoc Thai 2019;102:259–63. http://www.jmatonline.com
22 McBride GM, Stevenson R, Zizzo G, et al. Use and experiences of galactagogues while breastfeeding among Australian women. PLoS One 2021;16:e0254049.34197558
23 Krungkraipetch K, Kwanchainon C. The use of Thai herbal galactogogue, 'Plook-Fire-Thatu', for postpartum heat re-balancing. Afr J Reprod Health 2023;27:85–98.37742337
24 Tahiru R, Amoako M, Apprey C. Effect of a ginger-spiced millet-soya drink and breastfeeding education on prolactin levels and breast milk volumes in postpartum mothers in northern Ghana: a randomized controlled trial. Int Breastfeed J 2025;20:67.40855498

## Substance Identification

### Substance Name

Ginger

### Scientific Name

Zingiber officinale

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Phytotherapy

Plants, Medicinal